# Topotecan

CASRN: 123948-87-8

## Drug Levels and Effects

### Summary of Use during Lactation

Most sources consider breastfeeding to be contraindicated during maternal high-dose antineoplastic drug therapy. The manufacturer recommends that women not breastfeed during treatment with topotecan and for 1 week after the last dose. Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[1] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.[2]

### Drug Levels

Topotecan appears to be actively transported into breastmilk by multidrug transporter BCRP, which is encoded by ABCG2.[3]

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Urbaniak C, McMillan A, Angelini M, et al. (2014). Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome.
2 Stopenski S, Aslam A, Zhang X, et al. (2017). After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible?. Breastfeed Med.
3 Jonker JW, Merino G, Musters S, et al. (2005). The breast cancer resistance protein BCRP (ABCG2) concentrates drugs and carcinogenic xenotoxins into milk. Nat Med.

## Substance Identification

### Substance Name

Topotecan

### CAS Registry Number

123948-87-8

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents

Topoisomerase I Inhibitors